# Salmeterol

CASRN: 89365-50-4

## Drug Levels and Effects

### Summary of Use during Lactation

Although no published data exist on the use of salmeterol by mouth or inhaler during lactation, data from the related drug, terbutaline, indicate that very little is expected to be excreted into breastmilk.[1] The authors of several reviews and expert guidelines agree that use of inhaled bronchodilators is acceptable during breastfeeding because of the low bioavailability and maternal serum levels after use.[2-5]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Formoterol

### References

1 Boréus LO, de Château P, Lindberg C, et al. Terbutaline in breast milk. Br J Clin Pharmacol 1982;13:731-2 7082542
2 McDonald CF, Burdon JGW. Asthma in pregnancy and lactation. A position paper for the Thoracic Society of Australia and New Zealand. Med J Aust 1996;165:485-8 8937369
3 Nelson-Piercy C. Asthma in pregnancy. Thorax 2001;56:325-8 11254828
4 National Heart, Lung, and Blood, Institute, et al. NAEPP expert panel report. Managing asthma during pregnancy: recommendations for pharmacologic treatment-2004 update. J Allergy Clin Immunol 2005;115:34-46
5 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62 38513758

## Substance Identification

### Substance Name

Salmeterol

### CAS Registry Number

89365-50-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Bronchodilator Agents

Beta Adrenergic Agonists